# Sodium Stibogluconate

CASRN: 100817-46-7

## Drug Levels and Effects

### Summary of Use during Lactation

Sodium stibogluconate is no longer marketed in the US. Limited information indicates that maternal doses of sodium stibogluconate up to 1.4 grams daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants,[1] especially if the infant is older than 2 months. However, if withholding nursing during therapy is elected, breastfeeding can be reinstituted 24 to 48 hours after the last dose.

### Drug Levels

Maternal Levels. A nursing mother was given 1 dose of sodium stibogluconate 1 gram intravenously, followed by intravenous doses of 1.4 grams (about 20 mg/kg of antimony) daily for 14 days. Numerous milk samples were obtained before and for 25 hours after the fifth and fourteenth doses of the drug. The average of the 2 trough values of antimony in milk was 0.7 mg/L; the average of the 2 peak concentrations was 3.5 mg/L at 4 hours after the dose.[1] (For comparison, average background antimony breastmilk concentrations range from 0.14 to 0.4 mcg/L).[2,3] After the sodium stibogluconate doses, milk antimony levels declined with a half-life of about 6 hours to a value of 0.7 mg/L at 23 hours after the dose.[1] Using the average of the peak and trough values, a fully breastfed infant would receive about 0.3 mg/kg daily of antimony or about 1.6% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Berman JD, Melby PC, Neva FA. Concentration of Pentostam in human breast milk. Trans R Soc Trop Med Hyg 1989;83:784-5.2559511
2 Abdulrazzaq YM, Osman N, Nagelkerke N, et al. Trace element composition of plasma and breast milk of well-nourished women. J Environ Sci Health A Tox Hazard Subst Environ Eng 2008;43:329-34.18205064
3 Wappelhorst O, Kuhn I, Heidenreich H, et al. Transfer of selected elements from food into human milk. Nutrition 2002;18:316-22.11934544

## Substance Identification

### Substance Name

Sodium Stibogluconate

### CAS Registry Number

16037-91-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiprotozoal Agents